# Drugs and Lactation Database (LactMed) - About Dietary Supplements

Dietary supplement manufacturers or dietary ingredient suppliers are not required to test ingredients for safety in animals, or for safety or efficacy in women who are breastfeeding. Much of the available safety information comes from historical use and observational data.

Although the US Food and Drug Administration now requires dietary supplement manufacturers to report serious adverse events related to their products, only limited data involve lactation. Much post-marketing surveillance goes unreported. Reports that appear in the literature may be missing important information, such as testing for purity or contaminants.

One of the major limitations in reporting on dietary supplements is that the formulation and method of preparation of a product with a given trade name may change over time. For example, a combination product containing fenugreek may not contain the same ingredients today as it did a year ago. Trendy ingredients such as acai berry, pomegranate, etc. are often added and removed depending upon whether they are in vogue at any given time.

Although some individual dietary supplement ingredients may have been tested for their ability to pass into breastmilk, extrapolating this information to commercial products is problematic, because such products often differ in their composition and content of the same ingredients.

Many commercially available dietary supplements contain combinations of ingredients, such as herbs, vitamins, minerals, and omega-3 fatty acids, which make safety and efficacy assessments during breastfeeding challenging. In such combination products, it is difficult to pinpoint which one or more ingredients account for an adverse outcome.

Herbal extraction and formulation methods may vary over time, and result in products with variable amounts and proportions of ingredients.

For supplements containing an herb, manufacturers must be alert to test for heavy metals (e.g., cadmium, lead, mercury, arsenic) derived from the soil, and limit their levels. The presence of bacteria and fungi should also be minimized in herbal products used during lactation.